# Intrauterine Copper Contraceptive

## Drug Levels and Effects

### Summary of Use during Lactation

The copper IUD is acceptable to use during breastfeeding as a long-term contraceptive. It has been studied extensively during lactation in comparison with other forms of contraception and does not affect lactation performance or the milk copper concentration. Insertion of the device should be either in the first 48 hours after delivery or after 4 weeks postpartum. Breastfeeding may increase the risk of uterine perforation compared with those not breastfeeding at the time of IUD insertion; however, the absolute risk of perforation is low regardless of breastfeeding status.[1] The copper IUD is considered to be the most effective emergency contraceptive when inserted up to 5 days after unprotected intercourse.[2]

### Drug Levels

Maternal Levels. The effects on maternal copper metabolism during breastfeeding were compared in 3 groups of women. Two groups used copper-containing intrauterine devices (Copper 380A [n = 33] and Copper 200B [n = 29]), and a third group that did not use any IUD (n = 33) served as control. Milk samples were collected at 10 weeks postpartum before insertion and 6 weeks after insertion of the devices from 21 women in the first study group, 22 in the second study group and 20 women in the control group. Milk copper concentrations ranged between 0.25 and 0.31 mcg/gram of milk in the various groups before and after insertion. No statistically significant difference in milk copper levels were found before and after 6 weeks in the IUD groups and between the copper IUD groups and in women who did not receive a copper IUD.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

An open-label, two-center, randomized study in breastfeeding women compared a copper-containing IUD (Multiload Cu250) with an oral progestin-only contraceptive (lynestrenol 500 mcg). There were no statistically significant differences between groups with regard to infant anthropometric parameters and child health, except a lower incidence of child illness after 6 months in the lynestrenol group.[4]

Three hundred twenty lactating women were randomized to either a copper-containing IUD (Copper T380A; n =157) or to an IUD containing levonorgestrel (Mirena; n =163). Follow-up of infants for 1 year found no differences in growth and development or in duration of breastfeeding.[5]

A study compared the performance of a copper-containing IUD (Copper T 380A; n = 122), progesterone vaginal rings (n = 187), an oral progestin-only contraceptive (lynestrenol 500 mcg; n = 117), and levonorgestrel implants (Norplant; n = 120) in lactating women. After the first year of use, none of the methods affected the rate of infant growth.[6]

In a multicenter study, women who received a (Copper T 380A; N = 734) intrauterine device were compared to women who received a vaginal ring that released about 10 mg daily of progesterone (N = 802) beginning at day 29 to 63 postpartum. After the first year of use, no significant differences were found in the health and weight gain of the infants in the 2 groups.[7]

### Effects on Lactation and Breastmilk

A study compared prolactin serum concentrations in 40 women using a copper-containing intrauterine device (Copper T, Copper 7 or Soonawalla Y) to those of 20 women who were using condoms or practicing abstinence. Serum prolactin levels were higher in lactating women using a copper IUD (n = 7) than in lactating controls (n = 5) and in nonlactating women using a copper IUD (n = 33) than in lactating controls (n = 15). The authors also noted that they had seen 12 women with galactorrhea who were using a copper IUD, although they did not establish a cause-and-effect relationship. None of the study patients had galactorrhea.[8]

A 30-year-old woman had been using a copper IUD (Gravigard) for 19 months when she noted spontaneous galactorrhea, mostly from the left breast. Thyroid function and basal serum prolactin levels were normal and a brain tumor was ruled out. Three months later, the IUD was removed and milk production stopped 7 months after removal. The patient used no IUD for 3 months, then the copper IUD was replaced. Mild spontaneous lactation began 3 days after IUD placement, mainly from the right breast. The patient was taking no medications that would cause galactorrhea. The galactorrhea was probably caused by the IUD.[9]

Eighty-four women had 6 subdermal implants containing 100 mg each of progesterone inserted between days 30 to 35 postpartum as a contraceptive. Compared to women who received either a placebo or a Copper T intrauterine device, no difference was found in the breastfeeding rates during the first 9 months postpartum. At 1 year postpartum, more women in the Copper T group were breastfeeding than in the progesterone or placebo groups.[10]

An open-label, two-center, randomized study in breastfeeding women compared a copper-containing IUD (Multiload Cu250) with an oral progestin-only contraceptive (lynestrenol 500 mcg). There were no statistically significant differences between groups with regard to the amount of milk production or number of daily breastfeedings.[4]

A study compared the performance of a copper-containing IUD (Copper T 380A; n = 122), progesterone vaginal rings (n = 187), an oral progestin-only contraceptive (lynestrenol 500 mcg; n = 117), and levonorgestrel implants (Norplant; n = 120) in lactating women. After the first year of use, none of the methods affected breastfeeding performance. Users of the progestin-only methods experienced a period of lactational amenorrhea 4 to 5 months longer than did users of Copper T or untreated women.[8] In a multicenter study, women who received a (Copper T 380A; N = 734) intrauterine device were compared to women who received a vaginal ring that released about 10 mg daily of progesterone (N = 802) beginning at day 29 to 63 postpartum. No differences were found in the rate of breastfeeding between the 2 groups over the first year postpartum.[7]

A nonblinded, nonrandomized study compared a copper-containing IUD (Multiload Cu375; n = 40) to oral desogestrel 75 mcg daily (n = 42) begun 28 to 56 days postpartum for contraception. During the 7-month trial period, 1 woman dropped out of the trial because of diminished lactation compared with none in the IUD group. At the end of the first and fourth treatment cycle, there were no differences in the amount of milk produced between the desogestrel and IUD groups. No differences in triglyceride, protein or lactose content of milk were found at the end of 1, 4, and 7 cycles of therapy.[11]

### Alternate Drugs to Consider

Etonogestrel, Oral Levonorgestrel, Intrauterine Levonorgestrel, Levonorgestrel Implant, Medroxyprogesterone Acetate; Norethindrone; Progesterone

### References

1 World Health Organization. Medical Eligibility Criteria For Contraceptive Use: Sixth Ed. 2025. https://www.who.int/publications/i/item/9789240115583
2 ACOG Practice Bulletin No. 121: Long-acting reversible contraception: Implants and intrauterine devices. Obstet Gynecol 2011;118:184–96.21691183
3 Rodrigues da Cunha AC, Dorea JG, Cantuaria AA. Intrauterine device and maternal copper metabolism during lactation. Contraception 2001;63:37–9.11257247
4 Sinchai W, Sethavanich S, Asavapiriyanont S, et al. Effects of a progestogen-only pill (Exluton) and an intrauterine device (Multiload Cu250) on breastfeeding. Adv Contracept 1995;11:143–55.7491855
5 Shaamash AH, Sayed GH, Hussien MM, et al. A comparative study of the levonorgestrel-releasing intrauterine system Mirena(R) versus the Copper T380A intrauterine device during lactation: breast-feeding performance, infant growth and infant development. Contraception 2005;72:346–51.16246660
6 Díaz S, Zepeda A, Maturana X, et al. Fertility regulation in nursing women IX. Contraceptive performance, duration of lactation, infant gowth, and bleeding patterns during use of progesterone vaginal rings, progestin-only pills, Norplant® implants, and Copper T 380-A intrauterine devices. Contraception 1997;56:223–32.9408703
7 Sivin I, Díaz S, Croxatto HB, et al. Contraceptives for lactating women: A comparative trial of a progesterone-releasing vaginal ring and the copper T 380A IUD. Contraception 1997;55:225–32.9179454
8 Mehta S, Pawar V, Joshi J, et al. Serum prolactin levels in women using copper IUDs. Contraception 1977;15:327–34.560285
9 Giampietro O, Ramacciotti C, Moggi G. Normoprolactinemic galactorrhea in a fertile woman with a copper intra-uterine device (copper IUD). Acta Obstet Gynecol Scand 1984;63:23–5.6539040
10 Croxatto HB, Díaz S, Peralta O, et al. Fertility regulation in nursing women. II. Comparative performance of progesterone implants versus placebo and copper T. Am J Obstet Gynecol 1982;144:201–8.7114130
11 Bjarnadóttir RI, Gottfredsdóttir H, Sigurdardóttir K, et al. Comparative study of the effects of a progestogen-only pill containing desogestrel and an intrauterine contraceptive device in lactating women. BJOG 2001;108:1174–80.11762658

## Substance Identification

### Substance Name

Intrauterine Copper Contraceptive

### Drug Class

Breast Feeding

Lactation

Milk, Human

Intrauterine Devices, Copper

Contraceptive Devices

Contraceptive Agents, Female

Contraceptives, Postcoital